# Etizolam

CASRN: 40054-69-1

## Drug Levels and Effects

### Summary of Use during Lactation

Etizolam is not approved for marketing in the United States by the U.S. Food and Drug Administration. Very little information is available on the passage of etizolam into milk. An alternate drug is preferred, especially while nursing a newborn or preterm infant. If etizolam is used, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. One woman who was taking oral etizolam 1 mg daily donated milk samples between 3 and 6 days postpartum at 1 hour after a dose at the estimated peak serum concentration and just before a dose. She had a 1-hour milk level of 0.77 mcg/L and a trough milk level of 0.9 mcg/L.[1]

A woman took etizolam 1 mg and trazodone 50 mg once daily for 3 months postpartum. A milk sample on day 7 postpartum at 11.5 hours after the dose contained 1 mcg/L of etizolam. Four milk samples taken on day 35 postpartum from 15.5 to 25 hours after the dose contained etizolam in concentrations from 0.41 mcg/L to 0.2 mcg/L, respectively. On day 36 postpartum, milk samples at 6.5 and 13.5 hours after the dose contained 0.67 and 0.39 mcg/L of etizolam. The authors estimated that the maximum dose the infant would receive in milk was 0.15 mcg/kg daily which corresponds to 0.95% of the maternal weight-adjusted dosage.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman took etizolam 1 mg and trazodone 50 mg once daily for 3 months postpartum. Her infant was over 50% breastfed and demonstrated no adverse reactions at the 1- and 3-month checkups.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lorazepam, Oxazepam, Temazepam

### References

1 Nishimura A, Furugen A, Umazume T, et al. Benzodiazepine concentrations in the breast milk and plasma of nursing mothers: Estimation of relative infant dose. Breastfeed Med 2021;16:424-31.33449825
2 Saito J, Ishii M, Mito A, et al. Etizolam levels in maternal serum, cord blood, and breast milk during pregnancy and lactation: A case report. Psychiatry Clin Neurosci 2021;75:211-2.33733552

## Substance Identification

### Substance Name

Etizolam

### CAS Registry Number

40054-69-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines